# Trimipramine

CASRN: 739-71-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with trimipramine during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Published information on trimipramine was not found as of the revision date. Follow-up for 1 to 3 years in a group of 20 breastfed infants whose mothers were taking a tricyclic antidepressant found no adverse effects on growth and development.[1] Two small controlled studies indicate that other tricyclic antidepressants have no adverse effect on infant development.[2,3] In another study, 25 infants whose mothers took a tricyclic antidepressant during pregnancy and lactation were tested formally between 15 to 71 months and found to have normal growth and development.[4] However, none of the mothers in any of these studies took trimipramine.

### Effects on Lactation and Breastmilk

Trimipramine increases serum prolactin levels and has caused at least one case of galactorrhea.[5,6] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[7] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[8] None of the mothers were taking trimipramine.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[9]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Misri S, Sivertz K. (1991). Tricyclic drugs in pregnancy and lactation: A preliminary report. Int J Psychiatry Med.
2 Buist A, Janson H. (1995). Effect of exposure to dothiepin and northiaden in breast milk on child development. Br J Psychiatry.
3 Yoshida K, Smith B, Craggs M, et al. (1997). Investigation of pharmacokinetics and possible adverse effects in infants exposed to tricyclic antidepressants in breast-milk. J Affect Disord.
4 Nulman I, Rovet J, Stewart DE, et al. (2002). Child development following exposure to tricyclic antidepressants or fluoxetine throughout fetal life: A prospective, controlled study. Am J Psychiatry.
5 Wiegand M, Berger M. (1989). Action of trimipramine on sleep and pituitary hormone secretion. Drugs.
6 Wolfsperger M, Greil W. (2005). Galactorrhea during treatment with trimipramine. A case report. Pharmacopsychiatry.
7 Venkatesh KK, Castro VM, Perlis RH, et al. (2017). Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol.
8 Leggett C, Costi L, Morrison JL, et al. (2017). Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact.
9 Grzeskowiak LE, Saha MR, Nordeng H, et al. (2022). Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand.

## Substance Identification

### Substance Name

Trimipramine

### CAS Registry Number

739-71-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Tricyclic